# Measles-Mumps-Rubella Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and other expert opinion state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to MMR vaccine.[1,2] Breastfeeding appears to enhance the immunity retention of the measles vaccine. Breastfed infants should be vaccinated according to the routine recommended schedules. Although rubella vaccine virus might be excreted into milk, the virus usually does not infect the infant. If an infection does occur, it is well tolerated because the viruses are attenuated. No clear evidence exists of live attenuated measles or mumps vaccine virus excretion into breastmilk.[3] Lack of exclusive breast feeding until 5 months of age is a risk factor for an infant’s poor response to measles vaccination.[4]

### Drug Levels

Maternal Levels. No studies have evaluated the effects of the combined measles, mumps and rubella (MMR) vaccine during breastfeeding. A study of mothers vaccinated with the Cendehill strain of live, attenuated rubella virus found no transmission of the live virus to their breastfed infants.[5] However, rubella vaccine virus can appear in breastmilk and result in infections in some infants.[6-9]

In a prospective study, 169 mothers with low titers or either measles or rubella were given MR vaccine (Schwarz FF-8 strain/TO-336 strain; Takeda Pharmaceutical Co. Ltd, Osaka, Japan) at their 1-month postnatal checkup. Mothers provided 5 mL of breastmilk 2 weeks later. Rubella virus antigen was not detected in the breastmilk of any mothers. Measles virus RNA was isolated from the breastmilk of 2 vaccinated mothers.[10]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[1,11]

One 12-day-old breastfed infant developed a rubella infection 11 days after maternal vaccination with live rubella vaccine.[12] However, it is questionable if maternal vaccination was the cause of the infant's infection.[13]

Another breastfed infant had live rubella vaccine virus isolated from a throat swab after maternal immunization. The infant did not demonstrate seroconversion or adverse reactions.[6]

Some breastfed infants acquire passive immunity to rubella after maternal vaccination as do infants of mothers with natural rubella immunity. However, neither group of infants had a decreased response to rubella vaccine administered to the infant at 15 to 18 months of age.[7]

After immunization of their mothers with rubella vaccine, 25% of breastfed infants in one study showed transient seroconversion to rubella virus but without any clinical disease.[9]

In a prospective study of mothers given MR vaccine (Schwarz FF-8 strain/TO-336 strain; Takeda Pharmaceutical Co. Ltd, Osaka, Japan) at their 1-month postnatal checkup, measles virus RNA was isolated from the breastmilk of 2 vaccinated mothers. Neither of their breastfed infants had any clinical disease.[10]

Investigators in Lusaka, Zambia studied 200 children who had received a measles-containing vaccine. Half were HIV positive and half were HIV negative. Forty-five percent of the children were in the 10- to 15-year-old range. Blood samples were collected to determine IgG titer against measles. Children who had been breastfed had one-third the risk of having a low titer than those who had not been breastfed.[14]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
2 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
3 Alain S, Dommergues MA, Jacquard AC, et al. State of the art: Could nursing mothers be vaccinated with attenuated live virus vaccine? Vaccine 2012;30:4921–6.22659446
4 Kumari PL, Kutty AM. Measles specific immunoglobulin G response in children aged 4-12 year who received two doses of measles containing vaccine in infancy. Indian Pediatr 2021;58:250–2.33713061
5 Farquhar JD. Follow-up on rubella vaccinations and experience with subclinical reinfection. J Pediatr 1972;81:460–5.5065683
6 Buimovici-Klein E, Hite RL, Byrne T, et al. Isolation of rubella virus in milk after pospartum immunization. J Pediatr 1977;91:939–41.925824
7 Krogh V, Duffy LC, Wong D, et al. Postpartum immunization with rubella virus vaccine and antibody response in breast-feeding infants. J Lab Clin Med 1989;113:695–9.2732617
8 Losonsky GA, Fishaut JM, Strussenberg J, et al. Effect of immunization against rubella on lactation products. I. Development and characterization of specific immunologic reactivity in breast milk. J Infect Dis 1982;145:654–60.7077089
9 Losonsky GA, Fishaut JM, Strussenberg J, et al. Effect of immunization against rubella on lactation products. II. Maternal-neonatal interactions. J Infect Dis 1982;145:661–6.7077090
10 Hisano M, Kato T, Inoue E, et al. Evaluation of measles-rubella vaccination for mothers in early puerperal phase. Vaccine 2016;34:1208–14.26801065
11 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478
12 Landes RD, Bass JW, Millunchick EW, et al. Neonatal rubella following postpartum maternal immunization. J Pediatr 1980;97:465–7.7191002
13 Lerman SJ. Neonatal rubella following maternal immunization. J Pediatr 1981;98:668–9.7205504
14 Gardner PN, Hangoma J, Sialubanje C, et al. Factors associated with measles vaccine immunogenicity in children at University Teaching Hospitals, Lusaka, Zambia. PLOS Glob Public Health 2025;5:e0003954.40267112

## Substance Identification

### Substance Name

Measles-Mumps-Rubella Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines